# Prilocaine

CASRN: 721-50-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of prilocaine during breastfeeding. Based on the low excretion of other local anesthetics into breastmilk, a single dose of prilocaine injected during breastfeeding, such as for a dental procedure, is unlikely to adversely affect the breastfed infant. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. Topical application of prilocaine to the mother is unlikely to affect her breastfed infant if it is applied away from the breast. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.

## Substance Identification

### Substance Name

Prilocaine

### CAS Registry Number

721-50-6

### Drug Class

Breast Feeding

Lactation

Anesthetics, Local